# Perphenazine

CASRN: 58-39-9

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal doses of perphenazine up to 24 mg daily produce low levels in milk. Very limited long-term follow-up data indicate no adverse developmental effects when other phenothiazines are used alone. Monitor the infant for excessive drowsiness during breastfeeding and for developmental milestones, especially if other antipsychotics are used concurrently.

### Drug Levels

Maternal Levels. Steady-state perphenazine milk levels were measured in one woman while she was taking perphenazine at two different dosages. At a dose of 12 mg every 12 hours (480 mcg/kg daily) the drug concentration in a 24-hour milk collection was 3.2 mcg/L. At a dose of 8 mg every 12 hours, the average milk concentration in each of two 12-hour collection periods was 2.1 mcg/L. Milk was collected at this dosage in three 4-hour collection periods. Levels in fractionated 4-hour periods were as follows: 0 to 4 hours: 1.8 mcg/L; 4 to 8 hours: 3.1 mcg/L; and 8 to 12 hours: 2 mcg/L. The authors calculated that the breastfed infant would receive 0.1% of the maternal weight-adjusted dosage.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

One infant was breastfed from 1 month to 4.5 months of age during maternal intake of perphenazine 16 mg daily. The infant grew normally and no adverse drug effects were seen.[1]

### Effects on Lactation and Breastmilk

Galactorrhea has been reported with perphenazine.[2,3] Hyperprolactinemia appears to be the cause of the galactorrhea.[4-6] The hyperprolactinemia is caused by the drug's dopamine-blocking action in the tuberoinfundibular pathway. [7] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Haloperidol, Olanzapine, Quetiapine, Risperidone

### References

1 Olesen OV, Bartels U, Poulsen JH. Perphenazine in breast milk and serum. Am J Psychiatry 1990;147:1378-9.2400007
2 Basler RS, Lynch PJ. Black galactorrhea as a consequence of minocycline and phenothiazine therapy. Arch Dermatol 1985;121:417-8.4038862
3 Hooper JH, Jr, Welch VC, Shackelford RT. Abnormal lactation associated with tranquilizing drug therapy. JAMA 1961;178:506-7.14448766
4 Turkington RW. Prolactin secretion in patients treated with various drugs: Phenothiazines, tricyclic antidepressants, reserpine, and methyldopa. Arch Intern Med 1972;130:349-54.4560178
5 Turkington RW. Serum prolactin levels in patients with gynecomastia. J Clin Endocrinol Metab 1972;34:62-6.5061776
6 Meltzer HY, Fang VS. The effect of neuroleptics on serum prolactin in schizophrenic patients. Arch Gen Psychiatry 1976;33:279-86.1259521
7 Maguire GA. Prolactin elevation with antipsychotic medications: Mechanisms of action and clinical consequences. J Clin Psychiatry 2002;63 (Suppl 4):56-62.11913677

## Substance Identification

### Substance Name

Perphenazine

### CAS Registry Number

58-39-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipsychotic Agents

Phenothiazines